# Vardenafil

CASRN: 224785-90-4

## Drug Levels and Effects

### Summary of Use during Lactation

No published information is available on the use of vardenafil during breastfeeding. An alternate agent may be preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Sildenafil

## Substance Identification

### Substance Name

Vardenafil

### CAS Registry Number

224785-90-4

### Drug Class

Breast Feeding

Lactation

Phosphodiesterase 5 Inhibitors

Urologic Agents

Vasodilator Agents